# Iron Dextran

CASRN: 9004-66-4

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that trace amounts of iron dextran are excreted into breastmilk. No information is available on the clinical use of iron dextran during breastfeeding. However, intravenous iron dextran has been used in preterm infants for anemia of prematurity and would not be expected to cause any adverse effects in breastfed infants. An alternate intravenous drug with more published data available may be preferred.

For additional information on iron use during breastfeeding, see the monograph on Iron Salts.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date. Iron dextran manufacturers report that trace amounts of unmetabolized iron dextran are excreted into human milk.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ferric Carboxymaltose, Ferric Derisomaltose, Iron Sucrose

## Substance Identification

### Substance Name

Iron Dextran

### CAS Registry Number

9004-66-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Ferric Compounds

Hematinics

Iron Compounds